# Peginesatide

CASRN: 913976-27-9

## Drug Levels and Effects

### Summary of Use during Lactation

Peginesatide is no longer marketed in the US. No information is available on the clinical use of peginesatide during breastfeeding. Because of its large molecular weight of 4900 daltons, excretion into breastmilk should be minimal and it would not be expected to be absorbed from breastmilk by the infant. Polyethylene glycol is not excreted into breastmilk.[1] However, until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Epoetin Alfa

### References

1 Clowse M, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432

## Substance Identification

### Substance Name

Peginesatide

### CAS Registry Number

913976-27-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Colony-Stimulating Factors

Hematinics

Hematopoietic Cell Growth Factors